# Drugs and Lactation Database (LactMed) - Record Format

Generic Name:

The United States Adopted Name (USAN) of the active portion of the drug is listed. The specific salt (e.g., hydrochloride, sulfate) is usually not included, but the information should be considered to apply to all forms of the active drug unless noted otherwise. Database records usually refer to only one drug, but drugs which are marketed as both racemates and specific isomers are covered in the same record unless there is a good reason to list them separately. For botanical products, the most frequently used common name of the product is given. Numerous synonyms are embedded in LactMed records that allow searches on these names to link to the record.

Scientific Name:

The genus and species name of botanical products is listed here. This field is not used for other types of products.

Summary of Use During Lactation:

This section summarizes important points found in the body of the record. When conflicting data or recommendations are given in published case reports and reviews, the alternative viewpoints are presented with citations to the papers in which they are presented.

Drug Levels:

Some records have a brief description of the drug’s metabolism and issues involved in measuring and interpreting drug levels, such as the presence of active metabolites or interference by concurrent drug therapy.

<Maternal Levels.> Studies that measured drug concentrations in the breastmilk of humans are summarized. Study results are usually presented in chronological order. Whenever possible, the stage of lactation and time postpartum reported in the paper are presented. Drug concentrations are usually given in mg/L, which might be different from those used in the original paper; very low concentrations might be listed in other units (e.g., ng/L). Data from studies that report molar concentrations are converted to mg/L when the moiety being measured is clear. When a study finds no detectable amount of drug in the milk, the lower limit of the assay is given in parentheses when it is stated in the paper.

When possible, the weight-adjusted (i.e., mg/kg) percentage of the maternal dosage (relative infant dose, RID) ingested by a fully breastfed infant is given from the papers above, provided it was calculated using accepted methods. These include using milk-to-plasma (M/P) ratios calculated from the areas under the milk and plasma (or serum) concentration curves rather than random time points, and use of the standard infant intake of 150 mL/kg/day of milk. Where only case reports exist, a range of values might be given or a composite number might be calculated from several case reports and studies. Occasionally, the weight-adjusted percentage of the maternal dosage (RID) is calculated using an estimate of 60 kg for the maternal weight when the maternal weight is not stated. If an infant dosage is known, a percentage of the usual infant dosage is given. Estimates from the literature are referenced accordingly. Estimates by the author of the LactMed record explain the calculation method, but provide no specific literature citation for the calculated value.

For most drugs, a weight-adjusted percentage of the maternal dosage (RID) of 10% or less is considered relatively safe; caution is required for drugs excreted in dosages of 10 to 25% of the maternal dosage; and, those few drugs excreted in dosages over 25% of the maternal dosage are considered unacceptable.[1][2] However, if the infant is receiving mixed feeding, the percentages reported for fully breastfed infants should be adjusted downward in proportion to the percentage of intake of breastmilk before assessing the acceptability of the drug during breastfeeding. For drugs with unusually high or low clearance rates (short or long half-lives) the ranges might also need to be adjusted.

<Infant Levels.> This section contains serum or urine concentrations of the drug measured in breastfed infants. These data come from literature reports and are referenced accordingly.

Effects In Breastfed Infants:

This section reports all known side effects reported in the scientific literature with an assessment of the likelihood that the event was caused by the medication using the Naranjo adverse drug reaction assessment methodology.[3] In this system, an adverse reaction can be rated as "definite", "probable", "possible", or "unlikely" to have been caused by the medication in question. Virtually all reported adverse effects from medications in mother's milk are probable or possible. Unlikely reactions are usually not included unless they have been widely purported to be drug related. For grammatical purposes, the words "probably" and "possibly" are often used to designate the Naranjo categories of "probable" and "possible", respectively.

Few studies rigorously document the safety of maternal drug use during lactation, but if they exist, they are described here. Where documentation indicates some degree of safety during breastfeeding, or refutes or mitigates case reports of infant toxicity, these publications are described. When possible, the number of infants exposed to the drug in breastmilk without adverse reactions is enumerated.

Effects on Lactation and Breastmilk:

In this section, all known possible effects of the drug on lactation are listed. Information may be extrapolated from reports or studies on drugs with similar pharmacology that would be expected to have the same effect on lactation (e.g., dopaminergic drugs). In these cases, the drug that has actually caused the effect is stated. Because the mother and infant interact as a unit to regulate milk supply, plausible indirect effects of drugs that may affect the infant's ability to nurse adequately (e.g., sedation) or affect lactation (e.g., breast binding) are mentioned. Cases of gynecomastia and galactorrhea are reported in this section when relevant. Drug effects on serum prolactin are included in this section. These drugs might not have been reported to cause effects on lactation, but it is possible that they could affect lactation under some circumstances. In addition, any drug effects on the normal components of breastmilk are reported in this section.

Alternative Drugs to Consider:

This section lists drugs marketed in the United States that have uses similar to the drug under discussion and that have a record included in the LactMed database. The list of drugs may not be comprehensive and alternate drugs for uncommon uses may not be included. If the drug has more than one common use, the alternate drugs may be grouped according to the condition being treated. The clinician should consult the information provided on the alternate drugs and other prescribing information before deciding on the best course of therapy for a specific patient. Alternative substances for dietary supplements are usually not provided.

References:

This is a bibliography of all articles cited in the record. Each citation in the list is hypertext linked to the record of that article in PubMed if such record exists. If an article is not listed in PubMed, a hyperlink to the article using the digital object identifier (doi) is provided if it is available. This allows the reader to read the abstract or link to the full text document as their availability permits.

CAS Registry Number:

The Chemical Abstracts Service Registry Number of the parent compound (i.e., not the salt form) is listed. This field is searchable in LactMed.

Drug Class:

The drug class or classes to which the drug belongs are listed alphabetically. Classes are named using terminology identical to or consistent with MeSH headings for that class in order to ensure proper mapping by existing NLM algorithms. Searching this field in LactMed will provide a list of all drugs in a particular drug class in the database.

LactMed Record Number:

An internal NLM number that identifies the record.

Last Revision Date:

This field designates the date of the last revision to this record. The first 4 characters designate the year, the next 2 designate the month and the last 2 designate the day of the month. This field is not searchable.

## References

1 Bennett PN, ed. Drugs and human lactation, 2nd ed. Amsterdam. Elsevier. 1996.
2 Bennett PN, Notarianni LJ. (1996). Risk from drugs in breast milk: an analysis by relative dose. Br J Clin Pharmacol.
3 Naranjo CA, Busto U, et al. (1981). A method for estimating the probability of adverse drug reactions. Clin Pharmacol Ther.